# Adenovirus Type 4 and Type 7 Vaccine

## Drug Levels and Effects

### Summary of Use during Lactation

The adenovirus type 4 and type 7 vaccine is indicated only for military personnel between 17 and 50 years of age. No information is available on the use of adenovirus type 4 and type 7 vaccine during breastfeeding or its excretion in human milk. In general, vaccines given to a nursing mother do not affect the safety of breastfeeding for mothers or infants.[1] However, the product labeling recommends using caution in nursing mothers, because live virus is shed for 28 days following vaccination.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Kroger A, Bahta L, Long S, et al. CDC. General Best Practices for Immunization. 2024. https://www.cdc.gov/vaccines/hcp/acip-recs/general-recs/index.html

## Substance Identification

### Substance Name

Adenovirus Type 4 and Type 7 Vaccine

### Drug Class

Breast Feeding

Lactation

Milk, Human

Vaccines